# Chlorthalidone

CASRN: 77-36-1

## Drug Levels and Effects

### Summary of Use during Lactation

Although amounts of chlorthalidone in milk are not great, its slow clearance may lead to accumulation in the infant, especially while nursing a newborn or preterm infant. It may also suppress lactation. An alternate drug may be preferred.

### Drug Levels

Maternal Levels. In 7 women taking 50 mg of oral chlorthalidone daily prior to and after delivery, milk levels 3 days after delivery (collection times unspecified) ranged from 90 to 860 mcg/L. The authors estimated that the infant would receive about 180 mcg daily of chlorthalidone from milk at this maternal dosage.[1] This would amount to about 6% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Chlorthalidone has been used successfully to suppress lactation by giving 200 mg orally right after delivery, followed by 100 mg daily for 3 days in conjunction with fluid restriction and breast binding.[2] However, a comparative study found no difference between chlorthalidone 200 mg daily for 7.6 days and placebo in milk leakage and breast engorgement and pain.[3] The added contribution of the diuretic to fluid restriction and breast binding, which are effective in suppressing lactation, has not been studied. There are no data on the effects of diuretics on established, ongoing lactation.

### Alternate Drugs to Consider

Chlorothiazide, Hydrochlorothiazide

### References

1 Mulley BA, Parr GD, Pau WK, et al. Placental transfer of chlorthalidone and its elimination in maternal milk. Eur J Clin Pharmacol 1978;13:129-31.658109
2 Reiher KH. Suppression of lactation by stimulation of diuresis. Zentralbl Gynakol 1963;85:188-90.13973786
3 Vercruysse J. Inhibition of lactation. Comparative study of an estro-androgen and of a diuretic. Brux Med 1966;46:1258-66.6011090

## Substance Identification

### Substance Name

Chlorthalidone

### CAS Registry Number

77-36-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Thiazide Diuretics